# Methenamine

CASRN: 100-97-0

## Drug Levels and Effects

### Summary of Use during Lactation

Both the hippurate and mandelate salts of methenamine pass into milk in small quantities and appear acceptable to use, even while nursing a newborn.

### Drug Levels

Maternal Levels. Six mothers nursing newborn infants were given methenamine hippurate 1 gram orally. Five hours after the dose, a mean methenamine concentration of 7 mg/L was found in milk. In two other women, milk concentrations averaged 9.1 mg/L at 2 to 3 hours after a 1 gram dose of methenamine hippurate orally and 4.3 mg/L at 6 to 7 hours after the dose. Based on the amount of milk ingested, the authors calculated the dose the infants received to be 0.05 to 0.1 mg/kg, which is about 1% of the adult dose.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Four newborn infants were allowed to breastfeed in one study after a maternal dose of 1 gram of methenamine hippurate. No adverse effects were reported.[1]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Methenamine Hippurate, Methenamine Mandelate

### References

1 Allgén LG, Holmberg G, Persson B, et al. (1979). Biological fate of methenamine in man. Acta Obstet Gynecol Scand.

## Substance Identification

### Substance Name

Methenamine

### CAS Registry Number

100-97-0

### Drug Class

Breast Feeding

Lactation

Anti-Infective Agents, Urinary

Antibacterial Agents